# Vaccaria

## Drug Levels and Effects

### Summary of Use during Lactation

Vaccaria segetalis (cowherb seed) is a dry mature seed of Vaccaria hispanica seeds. The seeds are used in Chinese medicine (Wang Bu Liu Xing) to increase milk supply orally as a decoction.[1-4] The seeds contain quercetin and oleic acid as well as vaccarin. Vaccarin has a prolactin-like effect on the mammary epithelial cells and increase the number of prolactin receptors in animal studies.[4-6] Vaccaria seeds may also have mild estrogenic activity.[5] No well-performed clinical trials have been reported in English on the galactogogue effect of Vaccaria seeds taken orally in humans. It has reportedly been used frequently with Liquidambar formosana (Lu Lu Tong) as a galactogogue combination known as Wang Bu Liu Xing and Lu Lu Tong herb pair (WLHP).[4]

Vaccaria seeds are also topically applied with pressure to the earlobes in auricular therapy. Auricular therapy uses stimulation of acupoints on the ear corresponding to various anatomical sites and functions of the body for the diagnosis, treatment, and prevention of disease (see Acupuncture). Many studies applied Vaccaria seeds to press on ear acupoints. Two systematic reviews on auricular therapy to increase milk supply have come to differing conclusions. One review found a positive effect on milk production, onset of lactation, serum prolactin, breast fullness, neonate states, and frequency of newborn urination and defecation.[7] A more recent review found varying efficacy between studies and poor methodology that did not allow for a definitive conclusion on efficacy as a galactogogue.[8] No adverse effects were reported in any studies.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

In a randomized, nonblinded study of mothers who delivered a healthy infant at 37 weeks or beyond and expressed a desire to breastfeed, the Chinese herbal mixture Zengru Gao (n = 294) was compared to blank placebo (n = 294). Zengru Gao is composed of 8 herbs: Vaccaria seed, Medulla Tetrapanacis, Rehmanniae root, Angelica sinensis root, Paeoniae alba root, Ligusticum chuanxiong, Herba Leonuri (Motherwort Herb), and Trichosanthis root. The dose of Zengru Gao was 30 grams three times daily. On days 3 and 7, the group receiving Zengru Gao had more full and partial breastfeeding than those in the placebo group. In Zengru Gao group, 4 newborns had diarrhea, 3 newborns of allergies, 4 women of cough, 2 case of upper respiratory tract infections, 1 case of dry pharynx, and 1 case of neonatal hyperbilirubinemia. No complications were seen in the control group.[9]

A nonrandomized, nonblinded study of women who had undergone cesarean section compared those who received acupoint stimulation, breast massage and Vaccaria seed decoction twice daily for 7 days (n = 74) to those who received routine western medicine nursing intervention (instructing mothers to breastfeed, letting the baby contact and suck early after delivery, dietary guidance and psychological intervention, and instructing mothers to get more exercise). Serum prolactin was greater at 3 days postpartum in the acupoint group than the prenatal prolactin and at 1 day postpartum and in the control group. The acupoint group had a higher exclusive breastfeeding rate, higher milk yield at 48 hours postpartum, and milder breast tenderness than the control group. At 42 days postpartum the acupoint group had a greater infant weight than the control group.[10]

A randomized controlled study evaluated the efficacy of an herbal galactagogic decoction combined with auricular acupressure in improving lactation outcomes. The decoction was self-formulated consisting of Wang Bu Liu Xing (Vaccaria seeds) 10 grams, Glycyrrhiza glabra (licorice) 6 grams, Astragalus membranaceus 12 grams, Angelica sinensis (dong quai) 12 grams, Atractylodes macrocephala 10 grams, Tongzhi 30 grams, Codonopsis pilosula (dangshen) 12 grams, and Andrographis paniculata (green chiretta) 6 grams. One daily dose was decocted in water to yield approximately 200 mL of liquid, which was divided into 2 oral doses per day. Both groups were treated for 2 weeks. A total of 104 women with postpartum hypogalactia were randomly assigned to a control group (auricular acupressure alone, n = 52) or an intervention group (auricular acupressure plus herbal decoction, n = 52) for 2 weeks. Primary outcomes included milk production and formula supplementation, while secondary outcomes were serum hormone levels (estradiol, progesterone, and prolactin), symptom scores, psychological status, and clinical effectiveness. Compared with the control group, the intervention group demonstrated lower estradiol and progesterone levels, higher prolactin levels, increased milk production, and reduced formula supplementation.[11]

### References

1 Zheng T, Chen W, Hu H, et al. The prevalence, perceptions and behaviors associated with traditional/complementary medicine use by breastfeeding women living in Macau: A cross-sectional survey study. BMC Complement Med Ther 2020;20:122.32316951
2 Chao J, Ko CY, Lin CY, et al. Ethnobotanical survey of natural galactagogues prescribed in traditional Chinese medicine pharmacies in Taiwan. Front Pharmacol 2021;11:625869.33679390
3 Sibeko L, Johns T. Global survey of medicinal plants during lactation and postpartum recovery: Evolutionary perspectives and contemporary health implications. J Ethnopharmacol 2021;270:113812.33450288
4 Liao CC, Chien CH, Hsu TJ, et al. Advancing breastfeeding promotion: Leveraging integrative natural galactagogues and unveiling their potential roles-Insights from a 19-year Taiwan nationwide registry to address lactation insufficiency in postpartum women. Front Nutr 2024;11:1293735.38371501
5 Tian M, Huang Y, Wang X, et al. Vaccaria segetalis: A review of ethnomedicinal, phytochemical, pharmacological, and toxicological findings. Front Chem 2021;9:666280.33996757
6 Xue Q, Li H, Liu G, et al. Vaccarin treats lactation insufficiency through the ALKBH5-SFRP2-Wnt/β-catenin signaling pathway. J Ethnopharmacol 2025;348:119898.40311715
7 Chen ML, Tan JY, Suen LK. Auricular therapy for lactation: A systematic review. Complement Ther Clin Pract 2017;29:169–84.29122257
8 Lee B, Kwon CY, Lee SH. Effectiveness and safety of auriculotherapy for breastfeeding: A systematic review. J Tradit Chin Med 2020;40:721–37.33000573
9 Wang S, Zhang C, Li C, et al. Efficacy of Chinese herbal medicine Zengru Gao to promote breastfeeding: A multicenter randomized controlled trial. BMC Complement Altern Med 2018;18:53.29409494
10 Zhan J, Huang N, Meng N, et al. Lactation prescription plus acupoint stimulation improves breastfeeding quality and alleviates breast tenderness in parturients undergoing cesarean section. Am J Transl Res 2023;15:539–47.36777860
11 Li K, Cai D, Gao Z, et al. Effect of a herbal galactagogic formula combined with auricular acupressure on breast milk production and hormonal profiles in women with postpartum hypogalactia: A randomized controlled study. Afr J Reprod Health 2026;30:46–54.42138144

## Substance Identification

### Substance Name

Vaccaria

### Scientific Name

Vaccaria segetalis

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Galactogogues

Phytotherapy

Plants, Medicinal